# Argatroban

CASRN: 141396-28-3

## Drug Levels and Effects

### Summary of Use during Lactation

Because argatroban is poorly absorbed orally, it might not adversely affect a breastfeeding infant. However, no information is available on the use of argatroban during breastfeeding, so an alternate drug is preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

## Substance Identification

### Substance Name

Argatroban

### CAS Registry Number

141396-28-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Antithrombins